# Atomoxetine

CASRN: 83015-26-3

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of atomoxetine in milk is very low after usual doses and reports from the manufacturer found no serious adverse effects in two breastfed infants. Because of the low levels of atomoxetine in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. Monitor breastfed infants for excess sedation.

### Drug Levels

Maternal Levels. Ten women taking atomoxetine in daily doses of 40 to 100 mg donated milk aliquots from both breasts after a complete emptying with a pump and mixing. Mothers were requested to provide milk samples at home at 0, 1, 2, 4, 6, 8, 10, 12, 18, and 24 hours after drug administration at steady-state conditions. Because of the variety of doses used, the mean atomoxetine concentration in milk was adjusted to a daily dose of 80 mg. The average concentration in milk at this dose was 12 mcg/L, resulting in an RID of 0.19%. Using the maximum concentration of 39 mcg/L the worst-case RID would be 0.65%.[1]

A woman taking 40 mg of atomoxetine at bedtime donated breastmilk samples three days after delivery. The concentrations of atomoxetine in breastmilk were below the LLOQ before administration and 2.9 mcg/L at 2 hours after the dose, while 4-hydroxyatomoxetine concentrations were below the LLOQ before administration and 2.1 mcg/L at 2 hours after the dose. The secondary metabolite N-DAT was not detectable in breastmilk.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

The author of a review article reported that the manufacturer of atomoxetine (Eli Lilly and Co.) had reports of 2 infants who slept longer than usual after being breastfed by mothers who were taking atomoxetine. Neither of the infants experienced any serious adverse events. Dosages, duration of maternal therapy, infant age and extent of breastfeeding were not provided.[3]

Ten women taking atomoxetine in daily doses of 40 to 100 mg and nursing their 11 infants (one pair of twins) responded to a questionnaire concerning their infants’ health. The infants’ ages ranged from 11 days to 23 months. Breastfeeding ranged from exclusive to partial breastfeeding for <1 to 3 months during atomoxetine use. None of the mothers reported any suspected adverse effects or delayed development in their infants from drug exposure at the time the survey was completed.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(ADHD) Amphetamine, Dextroamphetamine, Lisdexamfetamine, Methylphenidate

### References

1 Yamada E, Trehan S, Stark A, et al. Atomoxetine as a viable ADHD treatment in breastfeeding mothers: Evidence from human milk pharmacokinetic analysis. J Clin Psychopharmacol 2026;46:16–22.41427840
2 Aoyagi R, Furugen A, Nishimura A, et al. UPLC-MS/MS method for quantifying non-stimulant ADHD medications in human breast milk and plasma: Application in a lactating patient receiving atomoxetine. J Pharm Biomed Anal 2026;279:117575.42202754
3 Besag FM. ADHD treatment and pregnancy. Drug Saf 2014;37:397–408.24794209

## Substance Identification

### Substance Name

Atomoxetine

### CAS Registry Number

83015-26-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic Uptake Inhibitors